# Tranylcypromine

CASRN: 155-09-9

## Drug Levels and Effects

### Summary of Use during Lactation

Because little information is available on the use of tranylcypromine during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with severe depression took tranylcypromine 100 to 120 mg daily, as well as pimozide, diazepam and alprazolam during pregnancy and postpartum. She breastfed her infant until about 2 weeks postpartum when the infant developed abdominal distension and feeding intolerance. The symptoms resolved on discontinuation of breastfeeding.[1]

### Effects on Lactation and Breastmilk

Nine subjects were treated with an average dose of 29 mg daily (range 10 to 40 mg daily) of oral tranylcypromine for an average of 16 days. Serum prolactin levels increased by 3 mcg/L.[2]The clinical relevance of these findings in nursing mothers is not known. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Nortriptyline, Paroxetine, Sertraline

### References

1 Kennedy D, Webster WS, Hill M, et al. (2017). Abnormal pregnancy outcome associated with high-dose maternal tranylcypromine therapy: Case report and literature review. Reprod Toxicol.
2 Price LH, Charney DS, Heninger GR. (1985). Effects of tranylcypromine treatment on neuroendocrine, behavioral, and autonomic responses to tryptophan in depressed patients. Life Sci.

## Substance Identification

### Substance Name

Tranylcypromine

### CAS Registry Number

155-09-9

### Drug Class

Breast Feeding

Lactation

Antidepressive Agents

Monoamine Oxidase Inhibitors